# Aprepitant

CASRN: 170729-80-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of aprepitant during breastfeeding. Because aprepitant is more than 95% bound to plasma proteins, the amount in milk is likely to be low. If the mother requires aprepitant, it is not a reason to discontinue breastfeeding. However, consideration should be given to any chemotherapy the mother is receiving.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Aprepitant

### CAS Registry Number

170729-80-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Neurokinin-1 Receptor Antagonists